# Vecuronium

CASRN: 86029-43-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of vecuronium during breastfeeding Because it is short acting, highly polar and poorly absorbed orally, it is not likely to reach the breastmilk in high concentration or to reach the bloodstream of the infant.[1,2] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. General anesthesia for cesarean section using vecuronium as a component may delay the onset of lactation.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized study compared the effects of cesarean section using general anesthesia, spinal anesthesia, or epidural anesthesia, to normal vaginal delivery on serum prolactin and oxytocin as well as time to initiation of lactation. General anesthesia was performed using propofol 2 mg/kg and rocuronium 0.6 mg/kg for induction, followed by sevoflurane and rocuronium 0.15 mg/kg as needed. After delivery, patients in all groups received an infusion of oxytocin 30 international units in 1 L of saline, and 0.2 mg of methylergonovine if they were not hypertensive. Fentanyl 1 to 1.5 mcg/kg was administered after delivery to the general anesthesia group. Patients in the general anesthesia group (n = 21) had higher post-procedure prolactin levels and a longer mean time to lactation initiation (25 hours) than in the other groups (10.8 to 11.8 hours). Postpartum oxytocin levels in the nonmedicated vaginal delivery group were higher than in the general and spinal anesthesia groups.[3]

### References

1 Spigset O. (1994). Anaesthetic agents and excretion in breast milk. Acta Anaesthesiol Scand.
2 Dalal PG, Bosak J, Berlin C. (2014). Safety of the breast-feeding infant after maternal anesthesia. Paediatr Anaesth.
3 Kutlucan L, Seker IS, Demiraran Y, et al. (2014). Effects of different anesthesia protocols on lactation in the postpartum period. J Turk Ger Gynecol Assoc.

## Substance Identification

### Substance Name

Vecuronium

### CAS Registry Number

86029-43-8

### Drug Class

Breast Feeding

Lactation

Muscle Relaxants

Neuromuscular Nondepolarizing Agents